# Lisuride

CASRN: 18016-80-3

## Drug Levels and Effects

### Summary of Use during Lactation

Lisuride is not approved for marketing in the United States by the U.S. Food and Drug Administration, but is available in other countries. It lowers serum prolactin and is approved in some countries for lactation suppression. Some experts recommend lisuride as a safer alternative to bromocriptine for lactation suppression, but others recommend avoiding all lactation suppressants.[1,2] Data are insufficient recommend one treatment for lactation suppression over another.[3]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Lisuride suppresses serum prolactin increases in a dose-related fashion.[4,5] Comparative studies have found lisuride comparable in efficacy to bromocriptine, although rebound lactation occurred in more patients treated with lisuride 0.4 mg daily than in those treated with bromocriptine 5 mg daily.[6,7] Rebound lactation appears to be less with a higher dose of 0.6 mg daily and with 15 days of therapy rather than 10 days.[8,9]

### Alternate Drugs to Consider

(Hyperprolactinemia) Bromocriptine, Cabergoline

### References

1 Marcellin L, Chantry AA. (2015). J Gynecol Obstet Biol Reprod (Paris).
2 Anon. (2012). Do not use drugs to delay the onset of lactation. Relieve the discomfort and wait. Prescrire Int.
3 Oladapo OT, Fawole B. (2012). Treatments for suppression of lactation. Cochrane Database Syst Rev.
4 Hardt W, Schmidt-Gollwitzer M, Horowski R. (1979). Suppression of lactation with lisuride. Gynecol Obstet Invest.
5 De Cecco L, Venturine PL, Ragni N, et al. (1979). Effect of lisuride on inhibition of lactation and serum prolactin. Br J Obstet Gynaecol.
6 Bohnet HG, Kato K, De Moll H. (1988). Prolactin stimulation tests: Different response patterns after bromocriptine, lisuride, and metergoline treatment of puerperal women. Obstet Gynecol.
7 Van Dam LJ, Rolland R. (1981). Lactation-inhibiting and prolactin-lowering effect of lisuride and bromocriptine: A comparative study. Eur J Obstet Gynecol Reprod Biol.
8 Sereno Coló JA, Navarrete Horta MT. (1994). Ginecol Obstet Mex.
9 Strahl HJ, Goretzlehner G, Strahl S, et al. (1985). Zentralbl Gynakol.

## Substance Identification

### Substance Name

Lisuride

### CAS Registry Number

18016-80-3

### Drug Class

Breast Feeding

Lactation

Antiparkinson Agents

Dopamine Agonists

Serotonin Receptor Agonists